# Tenofovir Disoproxil Fumarate

CASRN: 147127-20-6; 202138-50-9

## Drug Levels and Effects

### Summary of Use during Lactation

Tenofovir is available in the U.S. in two forms, tenofovir disoproxil fumarate and tenofovir alafenamide. Both release tenofovir, but tenofovir disoproxil fumarate releases tenofovir in the bloodstream whereas tenofovir alafenamide enters cells before releasing tenofovir. Most published experience is with tenofovir disoproxil fumarate in HIV therapy and prophylaxis. Exposure of the breastfed infant to tenofovir is trivial in HIV-positive mothers and in HIV-negative mothers treated for HIV prophylaxis or hepatitis B infection.[1,2] Among HIV-positive mothers who have breastfed during tenofovir disoproxil fumarate therapy no infant adverse effects have occurred up to 2 years of age. Achieving and maintaining viral suppression with antiretroviral therapy decreases breastfeeding transmission risk to less than 1%, but not zero. Individuals with HIV who are on antiretroviral therapy with a sustained undetectable viral load and who choose to breastfeed should be supported in this decision. Low tenofovir concentration in breastmilk and maternal serum and breastmilk HIV viral load are associated with a greater risk of HIV transmission from mother to infant. If a viral load is not suppressed, banked pasteurized donor milk or formula is recommended.[3,4]

In hepatitis B, expert reviews of available data and professional guidelines state that there is no justification for contraindicating the use of tenofovir during breastfeeding.[2,5-7] No differences exist in infection rates between breastfed and formula-fed infants born to hepatitis B-infected women, as long as the infant receives hepatitis B immune globulin and hepatitis B vaccine at birth.

### Drug Levels

Tenofovir has poor bioavailability and is available commercially as the more bioavailable tenofovir disoproxil fumarate. Tenofovir disoproxil fumarate releases tenofovir in the bloodstream. It is metabolized intracellularly to the active metabolite tenofovir diphosphate. The bioavailability of tenofovir and tenofovir diphosphate from breastmilk are not known, but presumed to be extremely low.

Maternal Levels. Five exclusively breastfeeding mothers received oral tenofovir disoproxil fumarate 300 mg plus emtricitabine 200 mg and nevirapine 200 mg at the start of labor, then oral tenofovir disoproxil fumarate 300 mg daily and emtricitabine 200 mg for 7 days postpartum. A total of 16 concurrent maternal blood and milk samples were collected on days 1, 2, 3, and 7 postpartum between 10 minutes and 21 hours after the mothers’ doses. Median peak and trough tenofovir concentrations in breastmilk were 14.1 mcg/L and 6.8 mcg/L, respectively. The authors estimated that an exclusively breastfed infant would receive about 0.03% of the proposed infant dose for tenofovir and achieve trivial infant serum concentrations that would likely have no adverse consequences.[8]

In a multicenter study in Malawi and Brazil, mothers were given a single dose of either 600 mg or 900 mg of tenofovir disoproxil fumarate during labor. Breastmilk samples were collected from mothers at various times postpartum. Tenofovir was detected (>2.5 mcg/L) in three-fourths of samples collected from 25 mothers during the first 2 days postpartum. Levels ranged from 6.3 to 17.8 mcg/L. At 4 to 6 days postpartum, only one milk sample of 21 had a detectable tenofovir level of 15.7 mcg/L.[9]

Women in Malawi received the option B+ regimen for prevention of mother-to-child transmission of HIV consisting of tenofovir disoproxil fumarate, lamivudine and efavirenz between 6 and 8 pm daily. The tenofovir disoproxil fumarate dose was not stated, but was presumably 300 mg daily. Milk samples collected in the morning from 33 women at month 1 postpartum had a median tenofovir concentration of 5 mcg/L (IQR 0 to 6.1 mcg/L). Milk samples collected in the morning from 47 women at month 12 postpartum had a median tenofovir concentration of 2.5 mcg/L (IQR 0 to 5.5 mcg/L).[10]

Fifty HIV-negative women who were nursing their infants were given pre-exposure prophylaxis daily with the combination of tenofovir disoproxil fumarate 300 mg and emtricitabine 200 mg by directly observed therapy for 10 days. On days 7 and 10 of therapy, peak milk samples were obtained 1 to 2 hours after a dose and trough samples were obtained 23 to 24 hours after the previous dose. The median peak milk tenofovir concentration was 3.2 mcg/L, and the trough concentration was 3.3 mcg/L. These values represent an estimated daily dosage of 0.47 to 0.49 mcg/kg, which is less than 0.01% of the proposed infant therapeutic dosage.[11]

Tenofovir was measured in 6 HIV-positive nursing mothers after a 300 mg dose of tenofovir disoproxil fumarate during ongoing therapy. Tenofovir reached a peak breastmilk concentration of 5.9 mcg/L (range 5.5 to 8.0 mcg/L) at an average of 3 hours (range 1 to 7) hours after the dose.[12]

Forty-eight Nigerian and Ugandan women took 300 mg of tenofovir disoproxil fumarate once daily as part of a combination therapy for HIV. Expressed milk samples were taken before the dose and at several times in the 12 hours after the morning dose (n = 30) or at 12, 16 and 20 hours after a dose given the previous evening (n = 18). The median peak breastmilk concentration from dried breastmilk spots was 5.98 mcg/L (IQR 0 to 8.05 mcg/L) at a median of 4 hours after the dose (IQR 1 to 6 hours).[13]

A meta-analysis of 4 previous studies[8,10,11,13] calculated that breastfed infants would receive only 0.03% of the recommend dose of tenofovir.[1]

Eleven mothers with chronic hepatitis B who had been taking tenofovir disoproxil fumarate 245 mg daily for at least one month donated breastmilk samples at a median of 12 hours (IQR 10 to 17 hours) after a dose. The median concentration in breastmilk was 6.69 mcg/L (IQR 4.88 to 7.03) mcg/L. The mean concentration was 6.41 mcg/L (range 4.44 to 10 mcg/L).[14]

Thirteen mothers taking tenofovir disoproxil fumarate 300 mg once daily provided 24 milk samples at a median of 16 hours after a dose. The median drug concentration in milk was 5 mcg/L, which resulted in an estimated infant dosage of 1 mcg/kg daily and a relative infant dose of 0.01% of the maternal weight-adjusted dosage.[15]

Thirty women with hepatitis B were treated with tenofovir disoproxil fumarate 300 mg daily from week 24 to 32 of pregnancy and until three months postpartum. Twenty-seven women collected milk samples at 24, 48 and 72 hours after a dose. Three women provide milk samples before a dose and at 0.5, 1, 2, 4, 8, 12, 24, 48 and 72 hours after a dose. The highest tenofovir concentration in 81 milk samples was 14.5 mcg/L on the first day after the dose. The median concentrations of tenofovir at 24, 48, and 72 hours after the last dose were 4 mcg/L, 2 mcg/L, and 1.1 mcg/L, respectively. The AUC_0-48 hours_ of tenofovir at three months postpartum was 3.1 times lower than at one month postpartum. Milk levels were 11.6% and 1% of maternal blood and amniotic fluid levels, respectively. The authors estimated that a fully breastfed infant would receive a dose of 0.21 to 1.76 mcg/kg daily, which represents up to 0.029% of the proposed pediatric therapeutic daily oral dose.[16]

A clinical trial compared the dapivirine vaginal ring 25 mg monthly to PrEP consisting of 200 mg emtricitabine and 300 mg tenofovir disoproxil fumarate daily as prophylaxis against HIV infection. In women randomized to PrEP (n = 48), tenofovir concentrations in breastmilk averaged 5.7 mcg/L during the first week of use and trended downward to 3.2 mcg/L in the third month of use. At 2 weeks after discontinuation, the milk tenofovir concentration was below the level of quantification (<1 mcg/L) in all women.[17]

Women in one arm of a 9-country clinical trial were randomized to receive dolutegravir 50 mg once daily with a fixed-dose combination of emtricitabine 200 mg plus tenofovir disoproxil fumarate 300 mg once daily. One infant blood sample was obtained at 6 weeks postpartum (n = 94). The median RID was 0.03%.[18]

A study compared two regimens for HIV prophylaxis (PrEP): emtricitabine 200 mg and either tenofovir disoproxil fumarate (presumably 300 mg) or tenofovir alafenamide 25 mg daily. Milk samples were collected at 8 weeks. Dried milk spot samples were obtained from 36 participants. Across both study arms the metabolite tenofovir diphosphate concentrations in breastmilk were not measurable (<8.3 nmol/L).[19]

Tenofovir vaginal gel. Seventeen women received 40 mg vaginal doses of 1% tenofovir gel daily for 6 days, with the first and last doses applied in clinic under observation. Two women reported using four doses at home, eleven women reported five doses, and two reported six doses. Breastmilk samples were collected before and 2, 4, and 6 hours after the first and last doses. Only 25% of milk samples contained detectable (>1 mcg/L) tenofovir post-dose on day 0, 12.5% at pre-dose on day 6, and 37.5% post-dose on day 6. Breastmilk tenofovir concentrations ranged from 0 to 0.75 mcg/L on day 0 and from 0 to 1.6 mcg/L on day 6.[20]

Infant Levels. Five infants were exclusively breastfed by 4 mothers who took tenofovir 245 mg (presumably 300 mg of tenofovir disoproxil fumarate) daily. At an average of 1.8 months of age, infant serum tenofovir concentrations were measured. Tenofovir was undetectable (<0.005 mg/L) in the serum of 4 of the infants, and 0.0055 mg/L in the serum of one infant.[21]

In a study of women and their infants receiving antiretroviral therapy for HIV infection, mothers who received a tenofovir disoproxil fumarate-containing regimen were compared to those who did not. The risk of infant death was reduced by 57% among infants who were breastfed and exposed to tenofovir compared to those who were not breasted. No alterations in growth and development were seen among breastfed infants in 2 years of follow-up.[22]

Blood samples were taken from 25 breastfed infants of mothers who were receiving option B+ regimen for prevention of mother-to-child transmission of HIV consisting of tenofovir disoproxil fumarate, lamivudine and efavirenz between 6 and 8 pm daily. The tenofovir dose was not stated, but was presumably 300 mg daily. The median morning infant plasma concentration of tenofovir at 6 months of age was 24 mcg/L (IQR 0 to 51.6 mcg/L). The median morning infant plasma concentration of tenofovir at 12 months of age was 0 mcg/L.[10]

Fifty HIV-negative women who were nursing their infants were given pre-exposure prophylaxis daily with the combination of tenofovir disoproxil fumarate 300 mg and emtricitabine 200 mg by directly observed therapy for 10 days. A single infant blood sample was obtained after the mother’s 7th dose. Of 49 infant blood samples collected, 46 had an undetectable (<0.31 mcg/L) concentration of tenofovir. The 3 with detectable levels contained 0.9, 0.9 and 17.4 mcg/L of tenofovir.[11]

Tenofovir disoproxil fumarate 300 mg daily was given to 6 HIV-positive nursing mothers. None of the breastfed infants had detectable tenofovir serum levels.[12]

Forty-eight Nigerian and Ugandan women took 300 mg of tenofovir disoproxil fumarate once daily either in the morning or evening as part of a combination therapy for HIV. Their exclusively breastfed infants were fed on demand and had blood samples taken at 2 and 8 hours after the dose. Dried blood spots were analyzed and no infants had a measurable (>4.2 mcg/L) tenofovir blood concentration.[13]

Eleven mothers with chronic hepatitis B who had been taking tenofovir disoproxil fumarate 245 mg daily for at least one month were breastfeeding their infants, 7 exclusively. Infant blood samples were obtained at a median of 12 hours (IQR 10 to 17 hours) after a dose. Infants had a median age of 3 months (IQR 2 to 6 months). All infants had undetectable (<4 mcg/L) tenofovir in their plasma.[14]

Five infants were breastfed by mothers taking tenofovir disoproxil fumarate 300 mg once daily, although the extent of breastfeeding was not sated. Infant serum concentrations taken between 2 and 19 hours after maternal drug intake at 1 month of age had undetectable amounts of tenofovir.[15]

A clinical trial compared the dapivirine vaginal ring 25 mg monthly to PrEP consisting of 200 mg emtricitabine and 300 mg tenofovir disoproxil fumarate daily as prophylaxis against HIV infection. In the infants of mothers randomized to PrEP (n = 48), no infants had quantifiable levels (31.3 fmol/punch) of tenofovir in dried blood spots at any timepoint between 1 week and 3 months of therapy.[17]

Women in one arm of a 9-country clinical trial were randomized to receive dolutegravir 50 mg once daily with a fixed-dose combination of emtricitabine 200 mg plus tenofovir disoproxil fumarate 300 mg once daily. One infant blood sample was obtained at 6 weeks postpartum (n = 94). The concentration in infant plasma was below the limit of quantification in almost all samples.[18]

Tenofovir vaginal gel. Seventeen women received 40 mg vaginal doses of 1% tenofovir gel daily for 6 days, with the first and last doses applied in clinic under observation. Two women reported four doses at home, eleven women reported inserting five doses, and two reported six doses. Infant blood was collected 6 hours after the maternal dose, which ranged from 1 to 4 hours after breastfeeding. Six infants (37.5%) had detectable tenofovir levels after the maternal dose on day 0, and 12 (75%) of infants %) had detectable tenofovir levels post-dose on day 6. In infants with detectable tenofovir serum concentrations, day 6 levels were higher (median 2.4 mcg/L) than on day 0 concentrations (median 0). No difference was seen in the anti-HIV activity of breastmilk between day 0 and day 6.[20]

### Effects in Breastfed Infants

Two newborn infants whose mothers were treated with tenofovir 245 mg (presumably 300 mg of tenofovir disoproxil fumarate) daily were exclusively breastfed for 3 months. At 4 months of age, neither showed any adverse outcomes on standard developmental parameters.[21]

Five women with hepatitis B infection were treated with tenofovir disoproxil fumarate 300 mg daily beginning in the third trimester of pregnancy and continuing postpartum. Although instructed not to breastfeed, 5 mothers breastfed (extent not stated) their newborn infants. No short-term adverse reactions were seen and the infants’ HBsAg was negative between 28 and 36 weeks of age.[23]

Fourteen mothers were treated with tenofovir disoproxil fumarate (dosage unspecified) during pregnancy (12 beginning in the first trimester) for hepatitis B. Three of the mothers breastfed while taking tenofovir. No adverse outcomes were noted in their breastfed infants up to 1 year of age.[24]

In a study of 50 infants breastfed by HIV-negative women who were given pre-exposure prophylaxis daily with the combination of tenofovir disoproxil fumarate 300 mg and emtricitabine 200 mg by directly observed therapy for 10 days, 2 infants reportedly had diarrhea lasting 2 to 3 days. No other side effects were reported.[11]

A study of 136 breastfed infants of mothers who took tenofovir disoproxil fumarate, efavirenz and lamivudine during pregnancy and postpartum (Option B+) in Malawi measured bone markers at 1, 6 and 12 months of age. Markers included bone-specific alkaline phosphatase and C-terminal telopeptide of type I collagen. Although tenofovir is known to affect bone density and bone mineral density in adults, no effects were seen on infants’ bone markers in the study.[25]

In a long-term study of tenofovir disoproxil fumarate for chronic hepatitis B, 3 women reportedly breastfed their infants (extent not stated). None of the infants had any adverse effects up to 1 year of age.[26]

A study of pregnant women with hepatitis B infection in China enrolled 143 women. Tenofovir disoproxil fumarate 300 mg daily was given starting at 22 to 33 weeks of pregnancy and continued postpartum. Thirty-one mothers breastfed (extent not stated) their infants who received standard hepatitis B prophylaxis. At 28 weeks postpartum, infant physical and neurologic development was within national standards, and none had developed hepatitis B infection. Mild side effects of cough and fever were reported in >5% of infants. Less frequent reactions included skin rash, diarrhea, vomiting, jaundice and pneumonia. All adverse effects were judged not to be related to the drug by the authors.[27]

A prospective cohort study in Malawi compared the infants of HIV+ mothers taking tenofovir disoproxil fumarate and efavirenz (n = 260) to infants of mothers who were HIV negative (n = 125). Infants were followed for growth and development for up to 18 months at which time there were 169 mother-infant pairs in the treatment group and 54 in the HIV-negative group. No difference was found in the growth and development of the breastfed infants of treated women compared to the infants of untreated mothers.[28]

Thirty women with hepatitis B were treated with tenofovir disoproxil fumarate 300 mg daily from week 24 to 32 of pregnancy and until three months postpartum. Their breastfed infants (extent not stated) had no abnormal signs or symptoms reported during maternal therapy. The physical growth parameters (height, weight and head circumference) stratified by sex of infants at birth, 3, 6 and 12 months postpartum were normal.[16]

An open-label, controlled, multicenter phase 3 trial women who were confirmed HIV-positive were randomized to receive one of 3 regimens: dolutegravir, emtricitabine, and tenofovir alafenamide (n = 208); dolutegravir, emtricitabine, and tenofovir disoproxil fumarate (n = 202); or efavirenz, emtricitabine, and tenofovir disoproxil fumarate (n = 207). The regimens were started at 14 to 28 weeks of pregnancy and continued postpartum. Of the 617 liveborn infants, 99% were breastfeeding at time of last infant HIV test, which was as late as 50 weeks of age. The mean infant duration on the study was 47.6 weeks of age. Infants who had any clinical or laboratory adverse event of grade 3 or higher ranged from 25 to 31%, but was not statistically significant between groups. Dolutegravir-containing regimens resulted in lower rates of virological failure, HIV drug resistance, and infant mortality up to 50 weeks postpartum compared with efavirenz, emtricitabine, and tenofovir disoproxil fumarate.[29]

A study compared the bone mineral densities of the infants of mothers with HIV infections who were exposed to maternal tenofovir disoproxil fumarate, emtricitabine and lopinavir-ritonavir or infant treatment with nevirapine for HIV prophylaxis throughout breastfeeding. Infants in the tenofovir disoproxil fumarate group had a slightly lower lumbar spine bone mineral content at week 26 postpartum than those receiving nevirapine, but the difference was judged to be not clinically relevant.[30]

In a randomized controlled trial, of 481 infants born to women, 335 (69.6%) infants had a minimum of one DXA scan of the whole body with head and lumbar spine between 6 and 74 weeks of age. No differences in bone mineral content between infants exposed to in utero and during breastfeeding to tenofovir disoproxil fumarate PrEP and unexposed infants in the first 18 months of life.[31]

A clinical trial compared the dapivirine vaginal ring 25 mg monthly to PrEP consisting of 200 mg emtricitabine and 300 mg tenofovir disoproxil fumarate daily as prophylaxis against HIV infection. In the infants of mothers randomized to PrEP (n = 48), no infants had reports of adverse events attributable to maternal therapy.[17]

A 5-year retrospective review compared the outcomes of women treated for hepatitis B who continued tenofovir disoproxil fumarate 300 mg daily postpartum and breastfed for 6 months or more to those who discontinued tenofovir disoproxil fumarate postpartum. The infants whose mothers continued tenofovir had lower rates of vertical hepatitis transmission and HBsAg positivity at 12 months compared to the discontinuation group. A higher proportion of infants in the tenofovir group had protective levels of anti-HBs at 12 months. Growth parameters were comparable between groups, but the tenofovir group had higher serum creatinine levels and lower serum phosphate levels, possibly indicating differences in renal function.[32]

Tenofovir vaginal gel. In a study of 17 nursing mothers who receive 40 mg of 1% vaginal tenofovir gel daily for 6 days, 4 of 17 infants had one or more adverse effects. There were a total of 8 adverse reactions. Seven were mild, and one had diarrhea that was thought to be related to tenofovir exposure.[20]

A nested case-control study compared infants who contracted HIV during breastfeeding (n = 31) to those who did not (n = 62). The odds of breastmilk HIV-1 transmission was associated with higher maternal plasma and breastmilk RNA viral load and lower breastmilk tenofovir concentrations.[33]

### Effects on Lactation and Breastmilk

A preliminary study of Ugandan women compared the milk composition of women receiving a tenofovir-based regimen for HIV to that of women who were not infected with HIV. Women with HIV on tenofovir-based antiretroviral therapy had higher milk calcium in the first months of lactation (193 and 188 mg/L compared to 177 and 172 mg/L at 2 and 14 weeks postpartum, respectively) and a greater overall reduction in the first year of lactation than women without HIV (10 and 23% decrease compared to 8% and 16% decrease at 6 and 12 months). However, the only statistically significant differences were at 14 weeks postpartum for serum calcium and at 6 to 12 months for the percentage decrease in serum calcium in the HIV-infected women.[34]

A study of mothers taking tenofovir disoproxil fumarate during pregnancy for prevention of mother-to-child transmission of hepatitis B compared the breastfeeding rates between mothers who stopped tenofovir at delivery, and at 4 or 12 weeks postpartum, according to maternal desire. The study found no differences in serum ALT values among the groups, but the breastfeeding rates at birth were markedly different. All women received standardized counseling that breastfeeding is permitted during tenofovir therapy and that encouraged breastfeeding. Eighty percent of those who discontinued tenofovir at delivery chose to breastfeed, while only 25% randomized to 4 weeks of tenofovir and 42% randomized to 12 weeks of tenofovir chose to breastfeed.[35] The fact that the study was neither randomized nor blinded and the dropout rate was rather high undermines the conclusions.

An observational study of women treated with tenofovir disoproxil fumarate for hepatitis B during pregnancy compared the breastfeeding rates of three groups of women. All women were given counseling on the safety of tenofovir during breastfeeding. Nevertheless, those who continued tenofovir for 4 or 8 weeks postpartum had much lower rates of breastfeeding, 25% and 42% respectively, than those who discontinued tenofovir at delivery, 80%.[35]

### Alternate Drugs to Consider

(Hepatitis B) Interferon Alfa, Lamivudine

### References

1 Bierhoff M, Smolders EJ, Tarning J, . Pharmacokinetics of oral tenofovir disoproxil fumarate in pregnancy and lactation: A systematic review. Antivir Ther 2019;24:529-40.31868655
2 Pak K, Ibrahim B, Saab S. Safety of tenofovir disoproxil fumarate among breastfeeding infants of patients with chronic hepatitis B: A systematic review. J Viral Hepat 2024;31:760-7.39206721
3 World Health Organization. Consolidated guidelines on HIV prevention, testing, treatment, service delivery and monitoring: Recommendations for a public health approach. 2021 https://www.who.int/publications/i/item/9789240031593
4 Department of Health and Human Services. Recommendations for the use of antiretroviral drugs during pregnancy and interventions to reduce perinatal HIV transmission in the United States. 2024 https://clinicalinfo.hiv.gov/sites/default/files/guidelines/documents/perinatal-hiv/guidelines-perinatal.pdf
5 WHO. Guidelines for the prevention, diagnosis, care and treatment for people with chronic hepatitis B infection. https://www.who.int/publications/i/item/9789240090903
6 EASL Clinical Practice Guidelines on the management of hepatitis B virus infection. J Hepatol 2025;83:502-83.40348683
7 Ghany MG, Pan CQ, Lok AS, . AASLD ISDA Practice Guideline on treatment of chronic hepatitis B. Hepatology 2026;83:974-97.41186418
8 Benaboud S, Pruvost A, Coffie PA, . Concentrations of tenofovir and emtricitabine in breast milk of HIV-1-infected women in Abidjan, Cote d’Ivoire, in the ANRS 12109 TEMAA Study, step 2. Antimicrob Agents Chemother 2011;55:1315-7.21173182
9 Mirochnick M, Taha T, Kreitchmann R, . Pharmacokinetics and safety of tenofovir in HIV-infected women during labor and their infants during the first week of life. J Acquir Immune Defic Syndr 2014;65:33-41.23979002
10 Palombi L, Pirillo MF, Marchei E, . Concentrations of tenofovir, lamivudine and efavirenz in mothers and children enrolled under the Option B-Plus approach in Malawi. J Antimicrob Chemother 2016;71:1027-30.26679247
11 Mugwanya KK, Hendrix CW, Mugo NR, . Pre-exposure prophylaxis use by breastfeeding HIV-uninfected women: A prospective short-term study of antiretroviral excretion in breast milk and infant absorption. PLoS Med 2016;13:e1002132.27676257
12 Waitt C, Diliiy Penchala S, Olagunju A, . Development, validation and clinical application of a method for the simultaneous quantification of lamivudine, emtricitabine and tenofovir in dried blood and dried breast milk spots using LC-MS/MS. J Chromatogr B Analyt Technol Biomed Life Sci 2017;1060:300-7.
13 Waitt C, Olagunju A, Nakalema S, . Plasma and breast milk pharmacokinetics of emtricitabine, tenofovir and lamivudine using dried blood and breast milk spots in nursing African mother-infant pairs. J Antimicrob Chemother 2018;73:1013-9.29309634
14 Erturk US, Mete B, Ozaras R, . Plasma and breast milk pharmacokinetics of tenofovir disoproxil fumarate in nursing mother with chronic hepatitis B-infant pairs. Antimicrob Agents Chemother 2021;65:e0111021.34310204
15 Aebi-Popp K, Kahlert CR, Crisinel PA, . Transfer of antiretroviral drugs into breastmilk: A prospective study from the Swiss Mother and Child HIV Cohort Study. J Antimicrob Chemother 2022;77:3436-42.36177836
16 Li S, Jin J, Jiang Y, . The low level of tenofovir in breast milk supports breastfeeding in HBV-infected mothers. Int J Antimicrob Agents 2023:106726.
17 Noguchi LM, Owor M, Mgodi NM, . Safety and drug quantification of the dapivirine vaginal ring and oral pre-exposure prophylaxis in breastfeeding mother-infant pairs (MTN-043): A phase 3B, open-label, randomised trial. Lancet HIV 2025;2:e180-e90.
18 Nguyen T, Chae JW, Ziemba L, . Breast milk transfer and infant exposures to dolutegravir, tenofovir, and tenofovir alafenamide: Results from IMPAACT 2010/VESTED. J Acquir Immune Defic Syndr 2026;101:296-301.41195894
19 Joseph Davey D, Dadan S, Bheemraj K, . Evaluation of pharmacokinetics of tenofovir alafenamide (TAF) and tenofovir disoproxil (TDF) in pregnant and postpartum women in South Africa: PrEP-PP PK study. Antiviral Res 2024;231:106014.39332538
20 Noguchi LM, Montgomery ET, Biggio JR, . Detectable tenofovir levels in breastfeeding infants of mothers exposed to topical tenofovir. Antimicrob Agents Chemother 2016;60:5616-9.27401570
21 Gouraud A, Millaret A, Bernard N, . Tenofovir exposure through breast feeding: Serum concentrations in neonates and clinical follow-up. Fundam Clin Pharmacol 2012;26 (Suppl 1):9. doi:10.1111/j.1472-8206.2012.01032.x
22 Gibb DM, Kizito H, Russell EC, . Pregnancy and infant outcomes among HIV-infected women taking long-term ART with and without tenofovir in the DART trial. PLoS Med 2012;9:e1001217.22615543
23 Pan CQ, Mi LJ, Bunchorntavakul C, . Tenofovir disoproxil fumarate for prevention of vertical transmission of hepatitis B virus infection by highly viremic pregnant women: A case series. Dig Dis Sci 2012;57:2423-9.22543886
24 Ganne-Carrie N, Causse X, Zarski JP, . Efficacy and safety results of tenofovir DF (TDF) treatment from the first trimester in HBV pregnant women in real-life clinical practice. Hepatology 2013;58 (Suppl 1):664A-5A. doi:10.1002/hep.26727
25 Floridia M, Liotta G, Andreotti M, . Levels of bone markers in a population of infants exposed in utero and during breastfeeding to tenofovir within an Option B+ programme in Malawi. J Antimicrob Chemother 2016;71:3206-11.27494909
26 Marcellin P, Zoulim F, Hezode C, . Effectiveness and safety of tenofovir disoproxil fumarate in chronic hepatitis B: A 3-year, prospective, real-world study in France. Dig Dis Sci 2016;61:3072-83.26821154
27 Wang M, Bian Q, Zhu Y, . Real-world study of tenofovir disoproxil fumarate to prevent hepatitis B transmission in mothers with high viral load. Aliment Pharmacol Ther 2019;49:211-7.30506691
28 Kapito-Tembo AP, Bauleni A, Wesevich A, . Growth and neurodevelopment outcomes in HIV, tenofovir and efavirenz exposed breastfed infants in PMTCT Option B+ program in Malawi. J Acquir Immune Defic Syndr 2021;86:81-90.33027153
29 Chinula L, Ziemba L, Brummel S, . Efficacy and safety of three antiretroviral therapy regimens started in pregnancy up to 50 weeks post partum: A multicentre, open-label, randomised, controlled, phase 3 trial. Lancet HIV 2023;10:e363-e74.37167996
30 Vhembo T, Baltrusaitis K, Tierney C, . Bone and renal health in infants with or without breastmilk exposure to tenofovir-based maternal antiretroviral treatment in the PROMISE randomized trial. J Acquir Immune Defic Syndr 2023;93:431-7.37199427
31 Reddy K, Naidoo KL, Lombard C, . In-utero exposure to tenofovir-containing pre-exposure prophylaxis and bone mineral content in HIV-unexposed infants in South Africa. J Int AIDS Soc 2024;27:e26379.39528419
32 Han D, Gen X, Wang W, . Postpartum TDF continuation in high HBV-DNA mothers: safety for breastfeeding and enhanced infant immunity. Front Pediatr 2025;13:1743985.41736845
33 Owor M, Baltrusaitis K, DeMarrais P, . Associations of plasma and breast milk HIV RNA and tenofovir concentrations with risk of postnatal HIV transmission during breastfeeding among women with and without ARV exposure. J Acquir Immune Defic Syndr 2026;101:795-802.41837779
34 Nabwire F, Hamill MM, Fowler MG, . Milk calcium and phosphorus in Ugandan women with HIV on tenofovir-based antiretroviral therapy. J Hum Lact 2023;39:288-99.36715180
35 Li S, Jiang Y, Shi J, . Impact of stopping tenofovir disoproxil fumarate at various times on elevated postpartum ALT levels and breastfeeding in pregnant women with chronic hepatitis B: A prospective observational cohort study. BMC Pregnancy Childbirth 2025;25:900.40887644

## Substance Identification

### Substance Name

Tenofovir Disoproxil Fumarate

### CAS Registry Number

147127-20-6; 202138-50-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antiviral Agents

Anti-HIV Agents

Anti-Retroviral Agents

Reverse Transcriptase Inhibitors